# Diatrizoate

CASRN: 117-96-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of diatrizoate up to 38 g (containing 18.5 grams of iodine) produce low levels in milk. In addition, because diatrizoate is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. Guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives an iodine-containing contrast medium.[1-4]

### Drug Levels

A woman who was 10 days postpartum received diatrizoate meglumine intravenously in a dose equivalent to 306 mg of iodine for phlebography. Bound iodine (presumably diatrizoate and any metabolites) in breastmilk was measured. Iodine was not found in the breastmilk until 2.25 hours after the dose when a concentration of 20 mg/L was detected. At 7 hours, a peak concentration of 22 mg/L occurred. Breastmilk iodine concentrations dropped after that until the concentration was 7.4 mg/L at 27 hours after the dose.[5]

One woman who was 7 weeks postpartum received 50 mL of an iodinated contrast medium containing 38 grams of sodium and meglumine salts of diatrizoate by rapid intravenous injection for urography (intravenous pyelogram; IVP). The total dose of iodine in this dose was 18.5 grams. Milk samples were expressed at 6, 9, 13 and 16.5 hours after the dose. Diatrizoate was undetectable (<2 mg/L) in any of the milk samples.[6]

A woman received 300 mL of sodium and meglumine salts of diatrizoate by intravenous injection for pulmonary angiography for a suspected pulmonary embolism 48 hours after delivery by cesarean section. This dose contained a total of 93 grams of iodine. All milk produced for the next 5 days (collection method not stated) was saved for analysis. The total amount of iodine excreted into milk during the first 24 hours after the dose was 31 mg or 0.03% of the dose administered. On the second and third days after administration, 0.008% (7.6 mg) and 0.0005% (0.5 mg), respectively, of the iodine dose was excreted in milk. By day 5, the concentration of iodine in milk was 119 mcg/L, compared to the mean of 70 mcg/L in 200 samples of normal breastmilk in the same laboratory.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Iohexol

### References

1 Webb JA, Thomsen HS, Morcos SK, et al. The use of iodinated and gadolinium contrast media during pregnancy and lactation. Eur Radiol 2005;15:1234-40.15609057
2 Chen MM, Coakley FV, Kaimal A, et al. Guidelines for computed tomography and magnetic resonance imaging use during pregnancy and lactation. Obstet Gynecol 2008;112:333-40.18669732
3 Copel J, El-Sayed Y, Heine RP, et al. Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol 2017;130:e210-e6.28937575
4 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120-1. https://www.acr.org/Clinical-Resources/Contrast-Manual
5 Weyrauch U, Volkhardt V, Speck U. Transfer of amidotrizoate in maternal milk following phlebography in a patient 10 days post partum. Rofo 1977;127:275-6.143435
6 FitzJohn TP, Williams DG, Laker MF, et al. Intravenous urography during lactation. Br J Radiol 1982;55:603-5.7116094
7 Texier F, Roque D'Orbcastel, O, Etling N. Stable iodine level in human milk after pulmonary angiography. Presse Med (Paris) 1983;19:769.6220321

## Substance Identification

### Substance Name

Diatrizoate

### CAS Registry Number

117-96-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents